# Exemestane

CASRN: 107868-30-4

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of exemestane during breastfeeding. Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy. The manufacturer recommends that breastfeeding be discontinued during exemestane therapy and for 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Exemestane

### CAS Registry Number

107868-30-4

### Drug Class

- Breast Feeding
- Lactation
- Antineoplastic Agents
- Aromatase Inhibitors